# Ceftibuten

CASRN: 97519-39-6

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that ceftibuten produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Ceftibuten is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. After a single 200 mg oral dose of ceftibuten in 6 women, the drug was undetectable (<1 mg/L) at any time up to 24 hours after the dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Barr WH, Lin C-C, Radwanski E, et al. The pharmacokinetics of ceftibuten in humans. Diagn Microbiol Infect Dis 1991;14:93-100.2013216

## Substance Identification

### Substance Name

Ceftibuten

### CAS Registry Number

97519-39-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins